# Emapalumab

CASRN: 1709815-23-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of emapalumab during breastfeeding. Because emapalumab is a large protein molecule with a molecular weight of about 147,000 Da, the amount in milk is likely to be very low and absorption is unlikely because it is probably destroyed in the infant's gastrointestinal tract.[1] Until more data become available, emapalumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3 33956488

## Substance Identification

### Substance Name

Emapalumab

### CAS Registry Number

1709815-23-5

### Drug Class

Breastfeeding

Lactation

Milk, Human

Monoclonal Antibodies